# Vancomycin

CASRN: 1404-90-6

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates that intravenous vancomycin produces low levels in milk and because vancomycin is poorly absorbed orally, it is not likely to reach the bloodstream of the infant or cause any adverse effects in breastfed infants. No special precautions are required.

### Drug Levels

Maternal Levels. A single colostrum vancomycin level of 12.7 mg/L was found 4 hours after the end of the infusion of vancomycin 1 gram intravenously given every 12 hours in one woman. Her colostrum was obtained after delivery at a gestational age of about 35 to 38 weeks.[1] Assuming that the colostrum level is a peak level, an exclusively breastfed infant would receive a maximum of 1.9 mg/kg daily by mouth in breastmilk. The amount in mature milk might be lower. This dose is only about 4.8% of the oral vancomycin dose of 40 mg/kg daily used to treat Clostridioides difficile infection of the bowel in infants.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Clindamycin, Daptomycin, Doxycycline, Linezolid, Trimethoprim-Sulfamethoxazole

### References

1 Reyes MP, Ostrea EM, Jr, Cabinian AE, . Vancomycin during pregnancy: Does it cause hearing loss or nephrotoxicity in the infant? Am J Obstet Gynecol 1989;161:977-81.2801848

## Substance Identification

### Substance Name

Vancomycin

### CAS Registry Number

1404-90-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antibacterial Agents

Glycopeptides